# Timolol

CASRN: 26839-75-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the variability in excretion of timolol into breastmilk and minimal reported experience during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

Ophthalmic use of timolol by the mother should pose little risk to the breastfed infant, although some guidelines state that gel formulations are preferred over solutions.[1,2] To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue. The manufacturer of Combigan states that it is not recommended for use during lactation, but there is no evidence for this statement.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[3] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With less than 10% protein binding, 20% renal excretion and a relatively short half-life, timolol presents a moderate risk for accumulation in infants, especially neonates.

Maternal Levels. Timolol was measured in milk during the use of ophthalmic drops twice daily in one eye. Although the time of the previous dose was not stated, a predose milk level of 0.5 mcg/L was measured. One and one-half hours after a single drop of 0.5% timolol maleate, the milk level was 5.6 mcg/L. The authors estimated that use of 0.5% timolol drops in one eye twice daily gave the infant 0.63% of a cardiac dose and treatment of both eyes would be 1.25% of a cardiac dose.[4]

A 32-year-old woman was using ophthalmic drops containing 0.5% timolol and 0.2% brimonidine twice daily in the right eye for 6 months. Four milk samples were collected over 6 days, but the times with respect to dosages or nursing were not reported. Milk timolol concentrations ranged from 0 to 0.37 mcg/L. The authors estimated that the maximum dose that a fully breastfed infant would obtain would be 123 ng/kg daily or 0.012% of the weight-adjusted maternal dosage. If the mother had been applying the medication to both eyes, these values would be approximately doubled.[5]

Nine women taking oral timolol 5 mg three times a day had a mean milk timolol level of 15.9 mcg/L (range 2 to 55 mcg/L). In 4 women taking 10 mg three times a day, the mean milk timolol levels was 41 mcg/L (range 7 to 88 mcg/L). The time after the dose when milk was sampled was not stated. In these cases it was estimated that a fully breastfed infant would receive between 0.96 to 1.2% of the maternal weight-adjusted dosage.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None reported, but beta-adrenergic blocking drugs with similar breastmilk excretion characteristics have caused adverse effects in breastfed newborns.[7,8]

No side effects were reported in one case report of a 9-week-old breastfed infant whose mother was using 0.5% ophthalmic timolol drops twice daily in one eye.[4]

A mother who was taking 2 drops of timolol 0.5% eye drops daily as well as using pilocarpine eye drops twice daily and acetazolamide 250 mg orally twice daily and delivered a preterm infant at 36 weeks of gestation. The infant began 5 months of exclusive breastfeeding at 6 hours after birth. On day 2, the infant developed electrolyte abnormalities consisting of hypocalcemia, hypomagnesemia, and metabolic acidosis. The infant was treated with oral calcium gluconate and a single dose of intramuscular magnesium sulfate. Despite continued breastfeeding and maternal drug therapy, the infant's mild metabolic acidosis disappeared on day 4 of life and the infant was gaining weight normally at 1, 3 and 8 months, but had mild hypotonicity. The authors considered the metabolic effects to be caused by transplacental passage of acetazolamide that resolved despite the infant being breastfed. The infant gained weight adequately during breastfeeding, but had some mild, residual hypertonicity of the lower limbs requiring physical therapy.[9]

A newborn infant was breastfed during maternal therapy with various combinations of ocular timolol, dipivifrin, dorzolamide, brimonidine and several doses of acetazolamide. Ultimately, the mother was treated with timolol gel-forming solution 0.5% and dorzolamide 2% drops. The drugs were given immediately following breastfeeding with punctal occlusion and no apnea or bradycardia was observed in the infant.[10]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or timolol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[11]

### Alternate Drugs to Consider

(Systemic) Propranolol, Labetalol, Metoprolol; (Ophthalmic) Levobunolol, Metipranolol; (Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid

### References

1 Belkin A, Chen T, DeOliveria AR, et al. A practical guide to the pregnant and breastfeeding patient with glaucoma. Ophthalmol Glaucoma 2020;3:79-89.32672600
2 Blumen-Ohana E, Sellem E. Pregnancy & glaucoma: SFO-SFG recommendations. J Fr Ophtalmol 2020;43:63-6.31813552
3 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.2878668
4 Lustgarten JS, Podos SM. Topical timolol and the nursing mother. Arch Ophthalmol 1983;101:1381-2.6615302
5 Madadi P, Koren G, Freeman DJ, et al. Timolol concentrations in breast milk of a woman treated for glaucoma: Calculation of neonatal exposure. J Glaucoma 2008;17:329-31.18552619
6 Fidler J, Smith V, de Swiet M. Excretion of oxprenolol and timolol in breast milk. Br J Obstet Gynaecol 1983;90:961-65.6626493
7 Schimmel MS, Eidelman AI, Wilschanski MA, et al. Toxic effects of atenolol consumed during breast feeding. J Pediatr 1989;114:476-8.2921694
8 Boutroy MJ, Bianchetti G, Dubruc C, et al. To nurse when receiving acebutolol: Is it dangerous for the neonate? Eur J Clin Pharmacol 1986;30:737-9.3770068
9 Merlob P, Litwin A, Mor N. Possible association between acetazolamide administration during pregnancy and metabolic disorders in the newborn. Eur J Obstet Gynecol Reprod Biol 1990;35:85-8.2311821
10 Johnson SM, Martínez M, Freedman S. Management of glaucoma in pregnancy and lactation. Surv Ophthalmol 2001;45:449-54.11274697
11 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7.556882

## Substance Identification

### Substance Name

Timolol

### CAS Registry Number

26839-75-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics

Antiglaucoma Agents